# Conbercept

CASRN: 1227158-72-6

## Drug Levels and Effects

### Summary of Use during Lactation

Conbercept is not approved for marketing in the United States by the U.S. Food and Drug Administration. Conbercept is a large protein molecule that inhibits vascular endothelial growth factor (VEGF). Amounts in milk after intravitreal injection is likely to be low and absorption by the infant is unlikely because it is probably partly destroyed in the infant's gastrointestinal tract and poorly absorbed orally, so systemic effects in infants are not expected. Since VEGF is present in human milk and is thought to help in maturation of the infant’s gastrointestinal tract, concern has been raised about the maternal use of VEGF inhibitors during breastfeeding.[1] However, only 1 of 3 mothers given conbercept had a small decrease in milk VEGF levels and it rebounded in a few days. Furthermore, the typical alternative to breastmilk is infant formula, which contains no VEGF.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Three women were given intravitreal injections of conbercept 0.05 mg in one eye to treat choroidal neovascularization. VEGF levels were measured in breastmilk after one injection. Two of the women had no decrease in breastmilk VEGF. The third woman had a decrease in her milk VEGF level on day 7 after the injection, from 1.72 ng/mL to 1.42 ng/mL, a decrease of 15%. Over the following 3 weeks, the VEGF level increased to the baseline value.[2]

### Alternate Drugs to Consider

(Intravitreal) Aflibercept, Bevacizumab, Ranibizumab

### References

1 Dalal PJ, Patel AL, Carle M, et al. (2020). Review of ophthalmic and breastfeeding medicine evidence: Real and theoretical risks of intravitreal anti-VEGF administration in lactating women. Retina.
2 Shao Z, Li S, Yu X, et al. (2021). Intravitreal conbercept for idiopathic choroidal neovascularization in nursing women. Breastfeed Med.

## Substance Identification

### Substance Name

Conbercept

### CAS Registry Number

1227158-72-6

### Drug Class

Breast Feeding

Lactation

Angiogenesis Inhibitors